# Nebivolol

CASRN: 99200-09-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of nebivolol during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[1] Accumulation of the drugs in the infant is related to the excretion rate. With 98% protein binding and a relatively long half-life, nebivolol presents a moderate risk for accumulation in infants.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Propranolol, Labetalol, Metoprolol

### References

1 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.2878668

## Substance Identification

### Substance Name

Nebivolol

### CAS Registry Number

99200-09-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic beta-Antagonists

Antihypertensive Agents

Vasodilator Agents